# Antivenin Latrodectus Mactans

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of antivenin Latrodectus mactans (black widow spider antivenin) during breastfeeding. Because it is a large protein molecule, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Antivenin Latrodectus Mactans

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antidotes

Antivenins